# Cycloserine

CASRN: 68-41-7

## Drug Levels and Effects

### Summary of Use during Lactation

Limited information from an old study indicates that maternal doses of cycloserine of 1 gram daily produce moderate levels in milk. If cycloserine is required by the mother, it is not a reason to discontinue breastfeeding, especially if the infant is older than 2 months. Exclusively breastfed infants should be monitored if this drug is used during lactation, possibly including measurement of serum levels to rule out toxicity if there is a concern.

### Drug Levels

Maternal Levels. In 5 women (time postpartum not stated) receiving oral cycloserine 250 mg 4 times daily, single milk levels from each of the mothers (collection times not stated) averaged 13.4 mg/L (range 6 to 19 mg/L).[1] It is estimated that a fully breastfed infant would receive 1.7 mg/kg daily or 11 to 28% of a usual infant dosage.[2,3]

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

No adverse effects were noted in 5 in breastfed infants (ages not stated) whose mothers were taking oral cycloserine 250 mg 4 times daily.[1]

Cycloserine was used as part of multi-drug regimens to treat 5 women with multidrug-resistant tuberculosis, 4 throughout pregnancy and postpartum and the other postpartum only. The infants were breastfed (extent and duration not stated). At age 1.25, 1.8, 3.9, 4.6 and 5.5 years, the children were developing normally except for a mild speech delay in one and hyperactivity in another.[4]

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### References

1 Morton RF, McKenna MH, Charles E. (1955-1956). Studies on the absorption, diffusion, and excretion of cycloserine. Antibiot Annu.
2 Snider DE, Powell KE. (1984). Should women taking antituberculosis drugs breast-feed?. Arch Intern Med.
3 Tran JH, Montakantikul P. (1998). The safety of antituberculosis medications during breastfeeding. J Hum Lact.
4 Drobac PC, del Castillo H, Sweetland A, et al. (2005). Treatment of multidrug-resistant tuberculosis during pregnancy: long-term follow-up of 6 children with intrauterine exposure to second-line agents. Clin Infect Dis.

## Substance Identification

### Substance Name

Cycloserine

### CAS Registry Number

68-41-7

### Drug Class

Breast Feeding

Lactation

Anti-infective Agents

Antibiotics, Antitubercular